# Etomidate

CASRN: 33125-97-2

## Drug Levels and Effects

### Summary of Use during Lactation

Amounts of etomidate in milk are very small and decrease rapidly. Existing data indicate that no waiting period is required before resuming breastfeeding after etomidate anesthesia. Breastfeeding can be resumed as soon as the mother has recovered sufficiently from general anesthesia to nurse. When a combination of anesthetic agents is used for a procedure, follow the recommendations for the most problematic medication used during the procedure. Monitor the infant for sedation and poor feeding.

### Drug Levels

Maternal Levels. Twenty women undergoing cesarean section received 0.3 mg/kg of etomidate intravenously for induction of anesthesia. Average colostrum levels were 79.3 mcg/L (range 0 to 420 mcg/L) at 30 minutes and 16.2 mcg/L (range 0 to 60 mcg/L) at 2 hours after the dose. Etomidate was not detected in any colostrum samples 4 hours after the dose.[1]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Dexmedetomidine, Methohexital, Propofol, Thiopental

### References

1 Esener Z, Sarihasan B, Guven H, et al. Thiopentone and etomidate concentrations in maternal and umbilical plasma, and in colostrum. Br J Anaesth 1992;69:586-8.1467101

## Substance Identification

### Substance Name

Etomidate

### CAS Registry Number

33125-97-2

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anesthetics, Intravenous

Hypnotics and Sedatives